# Methylene Blue

CASRN: 61-73-4

## Drug Levels and Effects

### Summary of Use during Lactation

An old paper found that breastmilk was not discolored after administration to nursing mothers, possibly indicating the lack of passage into milk. This is consistent with the drug being 94% protein bound. However, current labeling states that breastfeeding should be discontinued during and for up to 8 days after administration, apparently based on its half-life of 24 hours. No information is available on the safety of oral methylene blue during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In an old study, 150 mg of methylene blue was given (presumably intravenously) to nursing mothers on several occasions. The presence of the blue dye was verified in the urine, which it colored intensely. No bluish tint was observed in the milk, indicating that methylene blue was not excreted unchanged. During the day of ingestion and the following four days, the chromogen was sought in the milk using the usual method (acidification with acetic acid, boiling, centrifugation, and examination of the supernatant liquid). No trace of the chromogen could be detected.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Lesné E, Dreyfus-Sée O. Research on the transfer into milk of some diffusible substances (urea, NaCl, methylene blue). Acta Paediatr 1933;16:539-41. https://onlinelibrary.wiley.com/toc/16512227/1933/16/1

## Substance Identification

### Substance Name

Methylene Blue

### CAS Registry Number

61-73-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzyme Inhibitors

Coloring Agents